# Brewer’s Yeast

## Drug Levels and Effects

### Summary of Use during Lactation

The dead yeast cells of brewer’s yeast (Saccharomyces cerevisiae) is used as a dietary supplement to enhance milk production. No scientifically valid studies in humans have been performed that establish any effect of brewer’s yeast on milk supply. Although studies in ruminants indicate that brewer’s yeast might increase milk supply, the effect is attributed to improved nutrition (increases in vitamin B and chromium) rather than any specific effect on lactation.[1] Some side effects, mostly gastrointestinal, have been reported by nursing mothers taking brewer’s yeast. There are wide variations in the content of brewer’s yeast products.[1] In a US survey, of 190 mothers who used brewer’s yeast as a galactogogue 46% thought it increased milk supply.[2]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a survey of 108 nursing mothers in South Africa, one woman reported cramps in her infant after she used brewer’s yeast as a galactogogue.[3]

### Effects on Lactation and Breastmilk

In a survey of nursing mothers in Australia, 592 mothers were taking brewer’s yeast as a galactogogue. On average, mothers rated brewer’s yeast as slightly less than “moderately effective” on a Likert scale. Sixty-five mothers (11%) taking brewer’s yeast reported experiencing an adverse reaction, most commonly weight gain, stomach cramps, dry mouth and nausea. Twelve (2%) reported having more than one adverse effect.[4]

A multicenter, randomized, double-blind study compared brewers’ yeast and beta-glucan derived from Saccharomyces cerevisiae to placebo in the milk produced by mothers of infants in the NICU at 7 or 21 days postpartum. No meaningful differences in milk output was found between the two products and placebo.[5]

### References

1 Jia LL, Brough L, Weber JL. Saccharomyces cerevisiae yeast-based supplementation as a galactagogue in breastfeeding women? A review of evidence from animal and human studies. Nutrients 2021;13:727.33668808
2 Ryan RA, Hepworth AD, Lyndon A, . Use of galactagogues to increase milk production among breastfeeding mothers in the United States: A descriptive study. J Acad Nutr Diet 2023;123:1329-39.37236347
3 Steyn N, Zunza M, Decloedt EH. A cross-sectional descriptive study of breastfeeding behaviour and galactogogue use among private-sector patients in Cape Town, South Africa. S Afr J Obstet Gynaecol 2017;23:20-3. doi:10.7196/SAJOG.2017.v23i1.1116
4 McBride GM, Stevenson R, Zizzo G, . Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558
5 Grzeskowiak L, Williams L, Rumbold A, . Effect of brewers’ yeast or beta-glucan derived from Saccharomyces cerevisiae on breast milk supply following preterm birth: The BLOOM randomised controlled trial. Arch Dis Child Fetal Neonatal Ed 2026

## Substance Identification

### Substance Name

Brewer’s Yeast

### Scientific Name

Saccharomyces cerevisiae

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues